# Nimodipine

CASRN: 66085-59-4

## Drug Levels and Effects

### Summary of Use during Lactation

Based on limited data, amounts ingested by the infant are small and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman who was 3 days postpartum received 60 mg of nimodipine orally every 4 hours. She had a peak milk nimodipine level of about 3.5 mcg/L at 1 hour after a dose at steady-state. Milk levels from 1 hour before a dose (i.e., 3 hours after the previous dose) to simultaneously with a dose were less than 1 mcg/L.[1] Using the peak milk level data, the estimated maximum intake of an exclusively breastfed infant would be about 0.0009% of the maternal weight-adjusted dosage.

One woman who was 3 weeks postpartum was receiving nimodipine 2 mg per hour intravenously for 22 hours. The highest milk nimodipine concentration occurred 2 hours after completing the regimen and was 4.7 mcg/L. Four hours later the level had dropped to 0.63 mcg/L. It was estimated that a nursing infant would receive a maximum daily dosage of 0.092% of the mother's weight-adjusted dosage.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Tonks AM. (1995). Nimodipine levels in breast milk. Aust N Z J Surg.
2 Carcas AJ, Abad-Santos F, de Rosendo JM, et al. (1996). Nimodipine transfer into human breast milk and cerebrospinal fluid. Ann Pharmacother.

## Substance Identification

### Substance Name

Nimodipine

### CAS Registry Number

66085-59-4

### Drug Class

Breast Feeding

Lactation

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents